# Buckthorn

## Drug Levels and Effects

### Summary of Use during Lactation

The bark, stems and leaves of European buckthorn (Rhamnus catharticus), alder buckthorn (Rhamnus frangula) and California buckthorn (Rhamnus purshiana) contain anthraquinones that have potent cathartic properties. (Do not confuse these products with sea buckthorn [Hippophae rhamnoides]). Maternal intake of the cathartic buckthorn products might cause loose stools in breastfed infants and their use should be avoided.[1-3]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

No published information was found as of the revision date on European buckthorn or alder buckthorn. However, the chemical constituents of these products is similar to that of cascara sagrada (California buckthorn).

Maternal Levels. After administration of 65 mg of cascara sagrada as cascara fluidextract, cascara was qualitatively detected in the breastmilk of 5 of 10 women collected over 20 hours.[4] The sensitivity of the assay was about 1100 mg/L of cascara.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In 2 uncontrolled studies, a total of 10 of 22 breastfed infants appeared to have loose stools after administration of 65 mg of cascara as cascara fluidextract to their mothers.[4]

No cases of diarrhea were observed among the breastfed infants of 142 mothers who received 400 mg of cascara extract on day 3 postpartum.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Bisacodyl, Magnesium Hydroxide, Senna

### References

1 Lewis JH, Weingold AB, Committee of FDA-Related Matters American College of Gastroenterology. (1985). The use of gastrointestinal drugs during pregnancy and lactation. Am J Gastroenterol.
2 Hardy ML. (2000). Women's health series: Herbs of special interest to women. J Am Pharm Assoc (Wash).
3 Kopec K. (1999). Herbal medications and breastfeeding. J Hum Lact.
4 Tyson RM, Shrader EA, Perlman HH. (1937). Drugs transmitted through breast milk. Part I: Laxatives. J Pediatr.
5 Duncan AS. (1957). Standardized senna as a laxative in the puerperium. A clinical assessment. Br Med J.

## Substance Identification

### Substance Name

Buckthorn

### Scientific Name

Rhamnus catharticus Rhamnus frangula Rhamnus purshiana

### Drug Class

Breast Feeding

Lactation

Cathartics

Complementary Therapies

Gastrointestinal Agents

Phytotherapy

Plants, Medicinal